# Ethionamide

CASRN: 536-33-4

## Drug Levels and Effects

### Summary of Use during Lactation

Minimal information exists on the use of ethionamide during breastfeeding. Although some developmental problems have been reported in two infants exposed to ethionamide in breastmilk, their mothers were also exposed to several drugs during pregnancy and during breastfeeding, so the problems cannot necessarily be attributed to ethionamide. If ethionamide is required by the mother of an older infant, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Ethionamide was used as part of multidrug regimens to treat two pregnant women with multidrug-resistant tuberculosis, one throughout pregnancy and postpartum and the other postpartum only. The infants were breastfed (extent and duration not stated). At age 4.6 and 5.1 years, the children were developing normally except for a mild speech delay in one and hyperactivity in the other.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Drobac PC, del Castillo H, Sweetland A, et al. (2005). Treatment of multidrug-resistant tuberculosis during pregnancy: long-term follow-up of 6 children with intrauterine exposure to second-line agents. Clin Infect Dis.

## Substance Identification

### Substance Name

Ethionamide

### CAS Registry Number

536-33-4

### Drug Class

Breast Feeding

Lactation

Anti-infective Agents

Antitubercular Agents